# Zafirlukast

CASRN: 107753-78-6

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of zafirlukast during breastfeeding; however, manufacturer's data indicate that the dose in milk is low. Zafirlukast has been used in children as young as 12 months of age.[1] International guidelines consider that leukotriene receptor antagonists can be used during breastfeeding.[2,3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

The manufacturer reports that after administration of zafirlukast 40 mg twice daily to lactating women (number not reported), average steady-state milk concentrations were 50 mcg/L. Using these data, a fully breastfed infant would be expected to receive about 0.6% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Beclomethasone, Cromolyn, Montelukast, Terbutaline, Theophylline

### References

1 Berlin CM, Briggs GG. Drugs and chemicals in human milk. Semin Fetal Neonatal Med 2005;10:149-59 15701580
2 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208 31699837
3 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Zafirlukast

### CAS Registry Number

107753-78-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Leukotriene Antagonists